# Ecallantide

CASRN: 460738-38-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of ecallantide during breastfeeding. Because ecallantide is a large protein molecule with a molecular weight of about 7,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. Until more data become available, ecallantide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hereditary Angioedema) C1-esterase inhibitor

## Substance Identification

### Substance Name

Ecallantide

### CAS Registry Number

460738-38-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Kallikreins